# Psyllium

CASRN: 8063-16-9

## Drug Levels and Effects

### Summary of Use during Lactation

Few data are available on psyllium use during breastfeeding. However, the drug is not absorbed from the gastrointestinal tract, so it cannot enter the breastmilk. Psyllium is acceptable to use during breastfeeding.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Twenty postpartum mothers were given a laxative containing 2.7 grams of plantango (psyllium) and senna equivalent to 15 mg of sennosides a and b daily on days 2 to 4 postpartum. Of the 11 infants who were breastfed (extent not stated), none had any loose stools.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Constipation) Bisacodyl, Docusate, Magnesium Hydroxide, Sodium Phosphate; (Irritable Bowel Syndrome) Linaclotide, Lubiprostone, Plecanatide, Prucalopride, Tenapanor

### References

1 Lewis JH, Weingold AB, Committee of FDA-Related Matters American College of Gastroenterology. (1985). The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol.
2 Hagemann TM. (1998). Gastrointestinal medications and breastfeeding. J Hum Lact.
3 Faber P, Strenge-Hesse A. (1988). Relevance of rhein excretion into breast milk. Pharmacology.

## Substance Identification

### Substance Name

Psyllium

### CAS Registry Number

8063-16-9

### Drug Class

Breast Feeding

Lactation

Gastrointestinal Agents

Laxatives